# Arformoterol

CASRN: 67346-49-0

## Drug Levels and Effects

### Summary of Use during Lactation

Arformoterol is the R-enantiomer of the long-acting beta-2 adrenergic agonist, formoterol. Although no published data exist on the use of arformoterol by inhalation during lactation, data from the related drug, terbutaline, indicate that very little is expected to be excreted into breastmilk.[1] The authors of several reviews and an expert panel agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[2-6]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Salmeterol

### References

1 Lindberg C, Boréus LO, de Château P, et al. Transfer of terbutaline into breast milk. Eur J Respir Dis Suppl 1984;134:87-91 6586490
2 McDonald CF, Burdon JGW. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8.8937369
3 Nelson-Piercy C. Asthma in pregnancy. Thorax 2001;56:325-8 11254828
4 Taddio A, Ito S. Drugs and breast-feeding. In, Koren G, ed. Maternal-fetal toxicology. A clinician's guide. 3rd ed. New York. Marcel Dekker. 2001:177-32.
5 National Heart, Lung, and Blood, Institute, et al. NAEPP expert panel report. Managing asthma during pregnancy: recommendations for pharmacologic treatment-2004 update. 2004:1-57
6 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758

## Substance Identification

### Substance Name

Arformoterol

### CAS Registry Number

67346-49-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Beta Adrenergic Agonists

Bronchodilator Agents